# Disulfiram

CASRN: 97-77-8

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of disulfiram during breastfeeding, an alternate drug is preferred, especially while nursing a newborn or preterm infant. Drug labeling recommends that disulfiram not be given to nursing mothers.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Naltrexone

## Substance Identification

### Substance Name

Disulfiram

### CAS Registry Number

97-77-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Alcohol Deterrents

Acetaldehyde Dehydrogenase Inhibitors